# Dexmedetomidine

CASRN: 113775-47-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that very small amounts of dexmedetomidine are excreted into breastmilk for 4 to 6 hours after the end of an intravenous infusion. The drug is absent from breastmilk by 24 hours after the end of an infusion. The amounts in milk after sublingual use are expected to be less than after intravenous infusion. Because of the low dose in milk and its poor oral bioavailability, dexmedetomidine would not be expected to cause adverse effects in breastfed infants or neonates. Monitor the breastfed infant for irritability during sublingual use.

### Drug Levels

Maternal Levels. Following delivery by cesarean section, 4 women were given dexmedetomidine by continuous infusion 6 mcg/kg/hour for 10 minutes, followed by a dose of 0.2 to 0.7 mcg/kg/hour until closure of the incision, with total dosages ranging from 60 to 75 mcg. Breastmilk samples were collected at 0, 6 and 24 hours after the end of the infusion. The mean breastmilk dexmedetomidine concentration at the end of the infusion was 578 ng/L (range 390 to 594 ng/L). Dexmedetomidine was detected in human breast milk in 3 of the subjects 6 hours after discontinuation of dexmedetomidine, with an average of 24 ng/L. The drug was undetectable (<3 ng/L) in 1 breastmilk sample at 6 hours and in all samples at 24 hours after discontinuation. The authors calculated a weight-adjusted percentage of maternal dosage ranging from 0.04 to 0.098%.[1]

The same authors collected colostrum samples from 10 women at 6, 12 and 24 hours after returning to their ward after receiving dexmedetomidine for cesarean section delivery. Dexmedetomidine was given by continuous infusion 6 mcg/kg/hour for 10 minutes, followed by a dose of 0.7 mcg/kg/hour until closure of the incision. At 6 hours, two women had undetectable dexmedetomidine levels in colostrum, while the other 8 had dexmedetomidine levels ranging from 8.1 to 30.4 ng/L (median 12 ng/L). At 12 hours only one woman had dexmedetomidine detectable at 13.6 ng/L. Dexmedetomidine was undetectable in all women at 24 hours. The authors calculated a relative infant dose range of 0.02-0.062%.[2]

A nursing mother who was 4 weeks postpartum underwent a craniotomy for resection of a brain tumor. She was sedated with dexmedetomidine in a dose of 45 mcg followed by an infusion of 0.7 to 1 mg/kg/hour using a dosing weight of 95.6 kg, as well as propofol, and fentanyl. Complete milk collections with a breast pump and manual expression were collected every 3 to 4 hours during the procedure with the help of a lactation consultant. Intraoperative milk levels were 50 and 88 ng/L and postoperative levels about 48 minutes and 4 hours after discontinuation of the dexmedetomidine infusion were 89 and 15 ng/L, respectively. The authors noted that the dose in breastmilk is about 10% of the dose given intravenously to neonates.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A double-blind study randomized 160 women receiving an elective cesarean section under spinal anesthesia to receive either sufentanil for patient-controlled intravenous analgesia (standard care) or standard care plus dexmedetomidine. Dexmedetomidine was given as 5 mcg/kg, followed by a continuous infusion of 0.5 mcg/kg per hour until the end of surgery. Patient in this latter group received dexmedetomidine plus sufentanil for patient-controlled intravenous analgesia postoperatively for 2 days. Patients who received dexmedetomidine had a shorter time to the first lactation (28 vs 34 hours), achieved exclusive breastfeeding sooner (8 vs 11 days) and had a greater amount of milk on the second day postpartum.[4]

In a retrospective study of women undergoing cesarean section deliveries, 3 regimens were compared: dexmedetomidine before anesthesia and during delivery (n = 115), normal saline before anesthesia and during delivery and dexmedetomidine after delivery (n = 109), and normal saline before anesthesia and during delivery (n = 168). Women who received dexmedetomidine before anesthesia and during delivery consumed less sufentanil and ondansetron during their hospitalization and had a slightly shorter time to the first production of milk than women in the other groups (25 minutes vs 27 to 28 minutes).[5]

A randomized, blinded study compared post-cesarean section analgesia with sufentanil alone to sufentanil plus dexmedetomidine. The combination resulted in improved analgesia and a decreased time to first lactation (57 vs 51 hours).[6]

### Alternate Drugs to Consider

(Intravenous Sedation) Etomidate, Methohexital, Midazolam, Propofol

### References

1 Nakanishi R, Yoshimura M, Suno M, et al. Detection of dexmedetomidine in human breast milk using liquid chromatography-tandem mass spectrometry: Application to a study of drug safety in breastfeeding after Cesarean section. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1040:208-13.27856195
2 Yoshimura M, Kunisawa T, Suno M, et al. Intravenous dexmedetomidine for cesarean delivery and its concentration in colostrum. Int J Obstet Anesth 2017;32:28-32.28687146
3 Dodd SE, Hunter Guevara LR, Datta P, et al. Dexmedetomidine levels in breast milk: Analysis of breast milk expressed during and after awake craniotomy. Breastfeed Med 2021;16:919-21.34143658
4 Wang Y, Fang X, Liu C, et al. Impact of intraoperative infusion and postoperative PCIA of dexmedetomidine on early breastfeeding after elective cesarean section: A randomized double-blind controlled trial. Drug Des Devel Ther 2020;14:1083-93.32210537
5 Zhao W, Ma L, Wang J, et al. Retrospective comparison of the safety and effectiveness of dexmedetomidine versus standard of care before and during cesarean delivery in a maternity unit in Zhengzhou, China. Med Sci Monit 2020;26:e925709.33097682
6 Li J, Fu W, Wang N, et al. Effect of dexmedetomidine on the ED(50) and ED(95) of sufentanil in patient-controlled intravenous analgesia after cesarean section: A randomized, controlled, double-blind trial. Drug Des Devel Ther 2025;19:129-40.39807340

## Substance Identification

### Substance Name

Dexmedetomidine

### CAS Registry Number

113775-47-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anesthetics, Intravenous

Adrenergic alpha-2 Receptor Agonists

Analgesics